# Alcohol

CASRN: 64-17-5

## Drug Levels and Effects

### Summary of Use during Lactation

The effects of maternal alcohol (ethanol) ingestion during lactation are complex and depend on the pattern of maternal drinking. With casual alcohol use (such as 1 glass of wine or beer) it is best to wait 2 to 2.5 hours per drink before nursing. Alcohol can decrease milk production, with 5 drinks or more decreasing milk letdown and disrupting nursing until maternal alcohol levels decrease. Casual drinking does not appear to affect breastfeeding duration, but daily heavy use of alcohol (more than 2 drinks daily) might decrease the length of time that mothers breastfeed their infants. Women with a family history of alcoholism have a blunted prolactin response following breast stimulation and may breastfeed more frequently to compensate. Beer may increase serum prolactin levels during nursing because of polysaccharides from barley and hops. In a US survey of 102 mothers who used beer as a galactogogue, 42% thought it increased milk supply.[1] Although they may contain small amounts of alcohol, nonalcoholic cocktails and beer have minimal risks of infant alcohol exposure via breastmilk when consumed in moderation.[2] The use of alcohol-based hand sanitizers do not result in clinically relevant alcohol levels in breastmilk.[3]

Breastmilk alcohol levels closely parallel blood alcohol levels. The highest alcohol levels in milk occur 30 to 60 minutes after an alcoholic beverage, but food delays the time of peak milk alcohol levels. Nursing after 1 or 2 drinks (including beer) can decrease the infant's milk intake by 20 to 23% and cause infant agitation and poor sleep patterns. Nursing or pumping within 1 hour before ingesting alcohol may slightly reduce the subsequent amounts of alcohol in breastmilk.

The long-term effects of daily use of alcohol on infant development are unclear.[4] In infants who were subjected to high alcohol exposure during pregnancy, breastfeeding for 4 or more months markedly improved their scores on the Bayley scales of mental and psychomotor development compared to infants who were breastfed 3 months or less.[5] Heavy maternal use may cause excessive sedation, fluid retention, and hormone imbalances in breastfed infants. Greater or riskier alcohol consumption by nursing mothers may affect their children’s academic performance negatively in school. Preliminary data failed to find an increased risk of autism spectrum disorder or attention deficit hyperactivity disorder among the infants whose mothers used alcohol during breastfeeding.[6]

### Drug Levels

The alcohol (absolute ethanol) content of various drinks are as follows: 12 fluid ounces of beer (4.5%) = 12.6 g; 4 fluid ounces of table wine (12%) = 11.2 g; 1 fluid ounce of whiskey (100 proof) = 11.7 g. Blood alcohol is often reported as a percent; a concentration of 1 gram/L of alcohol is equivalent to 0.1%.

Maternal Levels. Five nursing mothers drank 0.4 grams/kg of alcohol as vodka (about 2 drinks for a 60 kg woman) over 1 minute after a standard breakfast and followed the drink with 80 mL of water. Blood and milk samples were collected over the next 3 hours. Eight additional women who were not breastfeeding followed the same protocol. Blood and milk alcohol levels had a later peak in lactating women (48 minutes) than in the nonlactating women (31 minutes). The bioavailability of alcohol in the lactating women was 74% of bioavailability in the nonlactating women; peak blood alcohol concentrations were numerically lower, but not statistically different from the nonlactating women. Milk alcohol levels closely paralleled blood alcohol levels with an average peak level of 0.44 grams/L, falling to about 0.35 grams/L at 90 minutes and about 0.09 grams/L at 3 hours after the dose.[7]

Twelve women between 4 and 41 weeks postpartum drank a 0.6 grams/kg of alcohol (about 3 drinks for a 60 kg woman) as a 15% solution over 5 minutes on an empty stomach. Blood and milk samples were obtained every 30 minutes for 2 hours. Alcohol concentrations in milk closely paralleled blood concentrations with the highest concentration averaging 1.05 grams/L at 1 hour after the dose. By 2 hours, the alcohol concentration in milk was 0.7 grams/L. Acetaldehyde, the major metabolite of alcohol, was undetectable in milk (assay limit not stated), but was detectable in maternal blood.[8]

Eight nursing mothers with infants ranging in age from 6 weeks to 2 years 9 months rapidly drank from 0.46 to 1.5 grams/kg of alcohol after a small meal. The time of peak alcohol concentrations varied from 1 to 2.5 hours after the initial ingestion of alcohol; however, some of the women drank their alcoholic beverage over a 1 hour period. Both fore- and hindmilk levels closely paralleled blood alcohol concentrations.[9]

Twelve nursing mothers with infants 25 to 216 days of age drank 0.3 grams/kg of alcohol (about 1.5 drinks for a 60 kg woman) in orange juice over 15 minutes in the morning. Prior food intake was not controlled. Milk samples were collected over 3 hours. The average peak level of alcohol in milk was 0.32 grams/L at 1 hour after the end of alcohol ingestion. Milk alcohol concentrations were 0.2 grams/L at 2 hours and 0.05 grams/L at 3 hours after the end of alcohol ingestion. Using the volume of milk taken by the infant at the one nearest nursing time, the authors estimated that a breastfed infant would receive between 0.5 to 3.3% of the mothers weight-adjusted dosage.[10]

Two groups of Mexican mothers were studied after receiving an average of either 0.21 or 0.4 grams/kg of alcohol as pulque after breakfast. Blood and milk samples were taken at 60, 90 and 120 minutes after pulque ingestion. They were exclusively breastfeeding their infants who were 3 to 21 months of age. Milk alcohol concentrations paralleled blood alcohol, with the highest milk levels at the first measurement at 60 minutes after ingestion. The group of mothers who consumed higher doses of alcohol eliminated it more slowly from blood and milk.[11]

A dose of 0.3 grams/kg of alcohol (about 1.5 drinks for a 60 kg woman) was administered over 15 minutes to 23 Chinese nursing mothers in a chicken-based soup following a cereal snack. Samples of blood and milk were taken during the following 135 minutes. The time of peak milk alcohol levels varied among women between 20 and 40 minutes after the dose. Milk alcohol levels were similar to blood levels but fell slightly more slowly. At 135 minutes after soup ingestion, the average breastmilk alcohol concentration was 9.05 mg/dL. The authors estimated that milk alcohol levels returned to 0 at about 175 minutes after ingestion.[12,13]

A study compared alcohol pharmacokinetics in 20 lactating women to that in 9 formula-feeding women and 15 nulliparous women. Women were evaluated twice, once fasting and once after a standard breakfast. Subjects received 0.4 grams/kg of alcohol (about 2 drinks for a 60 kg woman) in 2 doses 5 minutes apart, an hour after the meal on the fed days. Blood alcohol was estimated from breath alcohol levels over a 205 minute period. The average bioavailability of alcohol in the lactating women was 82% of bioavailability in the nonlactating women; peak blood alcohol concentrations in the lactating women were lower than in the nonlactating women, especially than the nulliparous women. Postpartum women, both lactating and nonlactating, felt sedated by the alcohol for a shorter period of time than nulliparous women.[14]

A nomogram was developed using pharmacokinetic principles to estimate the duration of alcohol in milk. The time to eliminate a standard drink of about 12 g of alcohol varied with the weight of the woman. For a 54 kg (120 lb.) woman, 2.5 hours after finishing the drink is required to eliminate the alcohol from her milk. For a 68 kg (150 lb.) woman, 2.25 hours is required; for an 82 kg (180 lb.) woman, 2 hours is required. For each additional drink consumed, the same number of hours should pass. For example, a 68 kg woman consuming 4 drinks should wait 9 hours before resuming breastfeeding to ensure that the infant does not receive any alcohol.[15] A study of 10 women of varying weights who consumed 16 fluid ounces of table wine found general agreement between their results and this nomogram.[16]

Sixteen lactating women who were 3 to 5 months postpartum pumped milk either 1 hour before or 0.6 hours after ingesting 0.4 grams/kg of ethanol. Blood alcohol concentrations were measured several times between 0.4 and 3.4 hours after alcohol ingestion. Each woman underwent this test on 2 occasions, once fasting and once after a meal. Eating before alcohol ingestion reduced and delayed the peak blood alcohol concentrations and reduced the total alcohol absorption and elimination rate. Pumping before alcohol ingestion caused similar effects, but of a smaller magnitude, and the two effects were additive or synergistic.[17] Milk alcohol concentrations were not measured, but likely paralleled the blood concentrations closely.

Fifteen women drank 1.5 L of nonalcoholic beer (0.42% alcohol by volume) over about 1 hour. Breastmilk samples were obtained at the completion of alcohol ingestion, plus 1 and 3 hours later. Two women had detectable levels of alcohol in their breastmilk at the termination of drinking (0.0021 and <0.001 grams/L). All other samples had undetectable (<0.0006 grams/L) levels of alcohol. The authors concluded that drinking nonalcoholic beer by a nursing mother is unlikely to affect their breastfed infant.[18]

Infant Levels. A computer simulation of breastfed infant serum alcohol levels after maternal ingestion of 250 mL of wine estimated resulting blood alcohol concentrations of 0.0033% in newborn infants and 0.0038% in 3-month-old infants.[19]

Another group estimated that if a woman ingested 4 standard drinks at once and breastfed her infant, the infant would attain a blood alcohol concentration of 0.049 g/L (0.0049%).[20]

### Effects in Breastfed Infants

A nursing mother was drinking large amounts of quinine wine, wine, champagne, beer and liquors. Her infant had been gaining 30 g of weight daily until he weighed almost 6 kg at 5 weeks of age. The infant had been restless and sleepless for several days when he suffered from violent fits and tonic-clonic seizures that required medical treatment. After he was taken off the mother's breast and began to be nursed by a wet nurse, his weight quickly dropped by 200 g in 3 days and fell into a pattern of calm sleep.[21]

A similar case of chronic heavy alcohol use by a nursing mother resulted in pseudo-Cushing syndrome in her 4-month-old breastfed infant. The infant had a bloated appearance, excessive wight gain and diminished length for age. The mother reported drinking 50 cans of beer weekly and "generous" amounts of other alcoholic beverages to increase her milk supply. The infant's symptoms resolved and growth pattern returned to normal after her mother stopped consuming alcohol.[22]

A series of 23 cases of severe thrombocytopenia and bleeding were reported among 21- to 60-day-old breastfed infants of Chinese women in Singapore over a 5-year period. None of the infants had received prophylactic vitamin K at birth and all of their mothers had been taking alcohol tonics after each meal beginning at 7 to 10 days after delivery which was a common practice among only the Chinese in the mixed ethnic population delivering at the hospital. Most of the infants also received 5 to 15 mL daily of "gripe water", which had an alcohol content of about 5%. The authors attributed these cases to the lack of prophylactic vitamin K (which was common practice at the time) and increased clotting factor degradation caused by alcohol.[23]

A woman who drank 750 mL of port wine in 24 hours noticed that her breastfed 8-day-old had a deep unarousable sleep, snoring, pain insensitivity, inability to suck, excessive perspiration and a feeble pulse. These symptoms were attributed to the very young age of the infant and the large amount of alcohol consumed.[24]

In a series of studies, investigators measured the effect of maternal alcohol use on their breastfed infants. In one study, 12 nursing mothers with infants 25 to 216 days of age drank 0.3 grams/kg of alcohol (about 1.5 drinks for a 60 kg woman) in orange juice over 15 minutes in the morning. On a separate occasion, they drank an equal volume of orange juice.[5] In another study, 12 nursing mothers nursing infants with a median age of 150 days drank 0.3 grams/kg of alcohol as beer or the same volume of nonalcoholic beer on a separate occasion.[25] In a third study, 12 nursing mothers with infants averaging 3.1 months of age drank 0.3 grams/kg of alcohol in orange juice over 15 minutes in the morning. On a separate occasion, they drank an equal volume of orange juice. In both studies, infants who drank milk that contained alcohol consumed 20 to 23% less milk during the 3- or 4-hour testing session, even though the time spent at the breast and number of sucks was unchanged. Mothers could perceive no difference in milk production or nursing behavior in their infants. Infants sucked more vigorously on a bottle containing their mothers' milk spiked with alcohol than on mothers' milk alone.[26] In a study in which infants were weighed by the mothers before and after each feeding for the next 16 hours (20 hours total), infants increased the number of feedings during the period of 8 to 12 hours after the alcohol intake such that the total amount of milk consumed during the 20-hour period did not differ between the alcohol and non-alcohol days.[27]

In studies that measured infant sleep, infants slept more frequently for shorter periods of time during the 3.5 to 4 hours after alcohol intake, whether it was after mothers drank 0.3 grams/kg of alcohol before breastfeeding or infants were given their mothers' milk spiked with an amount of alcohol (32 mg/100 mL) equivalent to that at 1 hour after maternal ingestion of 0.3 grams/kg of alcohol.[10,28,29] After ingesting the alcohol-containing milk after maternal consumption of 0.3 grams/kg of alcohol, 14 infants from 4 to 11 weeks of age infants were observed for 1 hour after milk ingestion. Their behavioral state changed more frequently, they slept less, cried more and startled more than after consuming milk without alcohol. Mother-infant interactions were more conflictive after alcohol intake which may partially explain increased infant arousal after maternal and infant alcohol ingestion.[30] A study that monitored the infants during the 24-hour period after maternal alcohol ingestion revealed that the infants compensated by spending more time in active (rapid eye movement) sleep from 3.5 hours to 24 hours with no further alcohol intake.[29]

Long-term effects of alcohol ingestion during breastfeeding were studied in 2 separate populations by one group of investigators. In the first study, alcohol intake of more than 1 drink daily during nursing produced a measurable decrease in motor function development, but not mental development at 1 year of age.[31] A later follow-up study found no decrements in performance of 18-month-old infants who were breastfed by mothers who consumed alcohol.[32]

Studies have examined the effects of ingestion of pulque, an alcohol-containing drink made from agave cactus, in rural Mexican mothers. Most of the women had ingested pulque daily during pregnancy and lactation. One study found no effects on weight or length growth velocity among the 32 infants at 3 and 6 months of age whose mothers ingested an average of about 30 g of alcohol daily compared to the infants of 62 infants who did not drink pulque.[33] Another study compared the growth of 40 infants whose mothers ingested pulque during pregnancy and lactation and 18 whose mothers did not. Mothers who consumed pulque ingested an average of 16.3 g daily. The infants whose mothers ingested pulque regularly had poorer growth between 1 and 57 months and smaller size at 57 months.[34]

A retrospective study of 222 inner city women reported only as an abstract found that 1-year-old breastfed infants scored higher on language skills and motor development and had fewer hearing problems than nonbreastfed infants. Alcohol use by the mothers did not decrease the beneficial effects of breastfeeding.[35]

A subgroup analysis of a large cohort study in Norway found that the infants of mothers who drank alcohol during breastfeeding had no greater risk of asthma, allergy or lower respiratory infections at 36 months of age than infants of mothers who did not drink.[36]

A study of low socioeconomic status women in South Africa evaluated development of their children at 7 years of age. Infants were grouped by whether their mothers drank alcohol during pregnancy and breastfeeding, breastfeeding only, or who abstained during breastfeeding, according to their mothers' recall at the time of the study. Compared to the infants whose mothers reported no drinking during breastfeeding (n = 64), those whose mothers reported drinking during breastfeeding only (n = 21) had lower verbal IQ, and were lower on growth charts.[37]

Ileus with abdominal distension was reported in three Chinese infants, one 19 days and two 3 weeks of age. All laboratory tests were normal. Their mothers had been eating "chicken wine" (chicken cooked in Chinese rice wine), which is a postpartum custom in Chinese culture. Two infants had measurable alcohol in their blood. One had an alcohol level of 4.3 mmol/L (198 mg/L or 0.02%), 30 hours after admission and the other had a level of 4.3 mmol/L, 15 hours after admission. In the third infant, alcohol was not measured. The authors concluded that the ileus was caused by alcohol intoxication in the infants.[38,39]

A prospective cohort study in Australia evaluated breastfed infants at 8 weeks and 12 months of age. Their mothers' alcohol use was tracked. Most mothers’ alcohol use was moderate, and drinking was almost always timed to minimize the amount of alcohol in breastmilk. Infants' social, mental and motor development were examined with the Ages and Stages questionnaires. The infants of mothers who used alcohol postpartum had no greater risk of adverse outcomes up to 12 months of age than the infants of mothers who were alcohol abstainers.[40]

A large, nested case-control study from a prospective cohort study in Australia compared infants who had been breastfed by mothers who drank alcohol during lactation to those whose mothers did not drink alcohol. The authors found that greater or riskier maternal alcohol intake determined by a maternal questionnaire was associated with decreased nonverbal reasoning at 6 to 7 years in a dose-dependent manner. This correlation was not found in children at 8 to 11 years of age. The frequency and quantity of milk consumed by infants and the timing of alcohol consumption in relation to breastfeeding were not known.[41] In a follow-up study, a dose-dependent association was found between increased or riskier maternal alcohol consumption while breastfeeding and decreased academic scores in children in both grades 3 and 5.[42] Another analysis of the data found that maternal alcohol consumption while breastfeeding was not associated with developmental health outcomes at 6 to 7 or at 10 to 11 years old.[43]

A search was performed of the shared database of all U.S. poison control centers for the time period of 2001 to 2017 for calls regarding medications and breastfeeding. Of 2319 calls in which an infant was exposed to a substance via breastmilk, 7 were classified as resulting in a major adverse effect and one of these involved alcohol. A 16-day-old infant was exposed to alcohol and unspecified benzodiazepines in breastmilk. The infant was admitted to the intensive care unit for cardiac and respiratory arrest. The dosages and extent of breastfeeding were not reported and the infant survived.[44]

In Australia, breastfed children with a language background other than English who performed better than native English-speaking students on a national standardized examination were found to have mothers who used less alcohol during pregnancy and had lower or less risky patterns of alcohol consumption while breastfeeding.[45]

A prospective study in Cape Town, South Africa compared 87 women who drank heavily during pregnancy and postpartum to 71 women who were abstainers or light drinkers. Postnatal alcohol exposure was not related to any anthropometry outcome with control for prenatal alcohol exposure and the relations of prenatal alcohol exposure to all anthropometry outcomes were virtually unchanged after control for postnatal alcohol exposure.[46]

A study in 103 Uruguayan mothers compared the development of infants of mothers (15.5%) who drank alcohol socially (up to 1 drink daily) to those who did not drink alcohol while breastfeeding. The study found no significant differences in the duration of breastfeeding and no relationship between alcohol consumption and infant development. However, growth was lower in the infants of mothers who consumed alcohol.[47]

One death was reported over 10 years in Taiwan in breastfed infants who were exposed to alcohol in breastmilk. A one-month-old female had postmortem levels of 0.023 mg/L of methamphetamine and 0.014 g/dL of alcohol. The cause of death was sudden infant death syndrome.[48]

### Effects on Lactation and Breastmilk

An expert panel stated that no conclusion could be drawn regarding any associations between maternal alcohol consumption during lactation and milk composition or milk production.[4]

Studies in mothers who were 2 to 8 days postpartum found that acute doses of alcohol infused intravenously reduced the oxytocin-mediated milk ejection reflex following infant sucking. The effect could be overridden by administration of exogenous oxytocin, indicating that alcohol inhibits oxytocin release, not its effect on the breast.[49] Alcohol doses of 0.5 to 0.99 grams/kg reduced oxytocin response to infants sucking by 18%; doses of 1 to 1.49 grams/kg reduced the response by 62%; and doses from 1.5 to 1.99 grams/kg reduced the response by 80%. Alcohol also increased the time for letdown to occur after nipple stimulation, from 29 seconds to 64 seconds with doses of 1 to 1.49 grams/kg and from 38 seconds to 331 seconds with doses of 1.5 to 1.99 grams/kg.[50] Other investigators found that drinking 100 mL of whiskey containing a total of 50 mL of absolute alcohol (about 4 drinks in a 60 kg woman) abolished the rise in serum oxytocin in response to breast stimulation with a breast pump in 16 nonpregnant, nonlactating women. Pretreatment with naloxone blunted alcohol's inhibitory effect on oxytocin release.[51]

Acute alcohol ingestion can either increase, decrease or have no effect on serum prolactin in nonpregnant, nonlactating women.[52-54]

Drinking 100 mL of whiskey containing a total of 50 mL of absolute alcohol lessened the increase in serum prolactin in response to breast stimulation with a breast pump in 11 nonpregnant, nonlactating women. Serum prolactin rose by 71% over baseline 20 minutes after stimulation without alcohol and only by 25% after alcohol consumption. Pretreatment with naloxone blunted alcohol's inhibitory effect, with the combination resulting in a 46% rise in serum prolactin over baseline.[55] It is not clear how these finding apply to lactating women.

A study on 28 lactating women who were 2 to 5 months postpartum found that the normal rise in serum prolactin was enhanced when alcohol in a dose of 0.4 grams/kg was taken 35 minutes before breast stimulation with a breast pump. In subjects with a first-degree relative with a history of alcoholism, the increase in serum prolactin was blunted in magnitude, rapidity, and duration both with and without prior alcohol consumption.[56]

Nursing mothers who ingested a 0.3 grams/kg dose of alcohol produced an average of 9.3% less milk 2 hours after the alcohol intake using a breast pump than they did when a nonalcoholic beverage was taken. The caloric content and composition of milk were not different during the two test periods.[57]

A 1-year long survey of 587 new mothers in Australia found that women who drank more than 2 standard drinks (10 grams or 12.5 mL of absolute alcohol) daily were twice as likely to discontinue breastfeeding by 6 months postpartum than mothers who reported use below this amount.[58]

Beer specifically has a reputation for increasing milk supply. A small crossover study found that ingestion of 1 liter of beer containing 6% alcohol by 11 nonpregnant, nonlactating women increased serum prolactin by nearly 2.5-fold 30 minutes after ingestion, but sparkling water with an equivalent amount of alcohol did not.[59] In another study, 7 nonpregnant, nonlactating women were given 800 mL of beer. Six drank beer containing 4.5% alcohol and 1 woman drank nonalcoholic beer. Their average peak serum prolactin increased to 2.4 times the baseline value between 60 and 105 minutes after ingestion. The one woman who drank nonalcoholic beer had an equivalent prolactin response. Pretreatment with naloxone had no effect on the prolactin response.[60] Animal studies indicate that a polysaccharide found in barley and malt is apparently responsible for the increase in prolactin after beer ingestion.[61,62]

The interaction between alcohol ingestion and breast pumping was investigated in a double-blind crossover study of 13 lactating women who were exclusively nursing 2- to 5-month-old infants. Compared to placebo, ingestion of 0.4 grams/kg of alcohol increased serum prolactin during the ascending phase of blood alcohol concentrations. Pumping milk from the breasts during the ascending phase of blood alcohol enhanced the prolactin response, but pumping during the descending phase of blood alcohol blunted the prolactin increase. Milk production was lower after alcohol ingestion, but unrelated to serum prolactin or alcohol blood concentrations.[63]

Twenty-three Taiwanese nursing mothers received a chicken-based soup following a cereal snack twice during the first 15 days postpartum. On one occasion the soup contained a dose of 0.3 grams/kg of alcohol (about 1.5 drinks for a 60 kg woman) and on the other occasion the soup was alcohol free. The time for the first drops of milk to be ejected after breast stimulation with a pump was longer (4.4 vs 2.9 seconds) after the alcohol-containing soup than with the nonalcoholic soup. In addition, the triacylglycerol (14.8 vs 12.3 mg/dL) and lactate (0.8 vs 0.6 mg/dL) content of breastmilk were greater at 135 minutes after ingesting the alcohol-containing soup than the nonalcoholic soup.[12]

A study compared the prolactin response of 7 non-alcohol-dependent women with a family history of alcoholism to 21 women with no family history of alcoholism. Participants were given a dose of 0.4 grams/kg of alcohol or placebo in a crossover fashion on 2 days. A breast pump was used to collect breastmilk beginning 35 minutes after ingesting the test solution. Blood samples were collected for prolactin before and at various times after beverage consumption. The women with a family history of alcoholism had reduced serum prolactin responses to breast stimulation whether or not they had consumed alcohol. They tended to nurse their infants more frequently than the other mothers, apparently as a method of compensation.[54]

Nursing mothers whose diets were supplemented with 660 mL daily of nonalcoholic beer had increases in the antioxidant capacity of their plasma and breastmilk. The coenzyme Q10 content of milk was higher at day 30 in the supplemented mothers. No change in oxidant markers was found in their infants' urine.[64]

A prospective cohort study in Australia evaluated breastfed infants at 8 weeks and 12 months of age. Most mothers’ alcohol use was considered to be moderate at 14 or fewer drinks per week. Alcohol use did not adversely affect the duration of breastfeeding.[40]

A study of first-time mothers in a Brazilian Baby Friendly hospital found that mothers who used alcohol during pregnancy had an increased risk of delayed lactogenesis II.[65]

A prospective study in Cape Town, South Africa compared 87 women who drank heavily during pregnancy and postpartum to 71 women who were abstainers or light drinkers. Neither prenatal nor postnatal alcohol consumption was related to the duration of breastfeeding, exclusive breastfeeding, exclusive formula, or mixed feeding.[46]

### References

1 Ryan RA, Hepworth AD, Lyndon A, et al. Use of galactagogues to increase milk production among breastfeeding mothers in the United States: A descriptive study. J Acad Nutr Diet 2023;123:1329–39.37236347
2 Bowdring MA, Sperling MM, Plummer XD, et al. Perinatal use of non-alcoholic beverages that mirror alcohol. Am J Obstet Gynecol 2025;233:e46–e9.40228708
3 Han AA, Buerger AN, Allen H, et al. Assessment of ethanol exposure from hand sanitizer use and potential for developmental toxicity in nursing infants. J Appl Toxicol 2022;42:1424–42.34991177
4 National Academies of Sciences, Engineering, and Medicine. Review of evidence on alcohol and health. Washington, DC: The National Academies Press. 2025. doi:10.17226/28582
5 Schaffer KE, Chambers CD, Garfein RS, et al. Breastfeeding and neurodevelopment in infants with prenatal alcohol exposure. Pediatr Res 2024;95:819–26.37845525
6 Gibson L, Porter M. Alcohol and tobacco use while breastfeeding and risk of autism spectrum disorder or attention deficit/hyperactivity disorder. J Autism Dev Disord 2022;52:1223–34.33893938
7 da-Silva VA, Malheiros LR, Moraes-Santos AR, et al. Ethanol pharmacokinetics in lactating women. Braz J Med Biol Res 1993;26:1097–103.8312842
8 Kesäniemi YA. Ethanol and acetaldehyde in the milk and peripheral blood of lactating women after ethanol administration. J Obstet Gynaecol Br Commonw 1974;81:84–6.4818321
9 Lawton ME. Alcohol in breast milk. Aust N Z J Obstet Gynaecol 1985;25:71–3.3862407
10 Mennella JA, Beauchamp GK. The transfer of alcohol to human milk. Effects on flavor and the infant's behavior. N Engl J Med 1991;325:981–5.1886634
11 Argote-Espinosa RM, Flores-Huerta S, Hernandez-Montes H, et al. Plasma clearance of ethanol and its excretion in the milk of rural women who consume pulque. Rev Invest Clin 1992;44:31–6.1523347
12 Chien YC, Huang YJ, Hsu CS, et al. Maternal lactation characteristics after consumption of an alcoholic soup during the postpartum 'doing-the-month' ritual. Public Health Nutr 2009;12:382–8.18426631
13 Chien YC, Liu JF, Huang YJ, et al. Alcohol levels in Chinese lactating mothers after consumption of alcoholic diet during postpartum "doing-the-month" ritual. Alcohol 2005;37:143–50.16713502
14 Pepino MY, Steinmeyer AL, Mennella JA. Lactational state modifies alcohol pharmacokinetics in women. Alcohol Clin Exp Res 2007;31:909–18.17433009
15 Ho E, Collantes A, Kapur BM, et al. Alcohol and breast feeding: Calculation of time to zero level in milk. Biol Neonate 2001;80:219–22.11585986
16 Palmquist M, Grainger D, Frazier L, et al. Elimination of alcohol from breast milk: Establishing guidelines for resumption of breast-feeding after alcohol consumption. Fertil Steril 2005;84 (Suppl. 1):S415. https://www.fertstert.org/article/S0015-0282(05)02543-4/fulltext
17 Pepino MY, Mennella JA. Effects of breast pumping on the pharmacokinetics and pharmacodynamics of ethanol during lactation. Clin Pharmacol Ther 2008;84:710–4.18596681
18 Schneider C, Thierauf A, Kempf J, et al. Ethanol concentration in breastmilk after the consumption of non-alcoholic beer. Breastfeed Med 2013;8:291–3.23484672
19 Mielke H, Gundert-Remy U, Partosch F, et al. Alcohol concentrations in breastfed babies - physiologically based modelling as a decision aid. Naunyn-Schmiedebergs Arch Pharmacol 2012;385 (Suppl. 1):59. doi:10.1007/s00210-01-0
20 Haastrup MB, Pottegard A, Damkier P. Alcohol and breastfeeding. Basic Clin Pharmacol Toxicol 2014;114:168–73.24118767
21 Budin P. Lecture VI The nursling: The feeding and hygiene of premature and full-term infants London Caxton Publishing Company 1907:85–101.
22 Binkiewicz A, Robinson MJ, Senior B. Pseudo-Cushing syndrome caused by alcohol in breast milk. J Pediatr 1978;93:965–7.722441
23 Hoh TK. Severe hypoprothrombinaemic bleeding in the breast fed young infants. Singapore Med J 1969;10:43–9.5803560
24 Bisdom W. Alcohol and nicotine poisoning in nurslings. JAMA 1937;109:178. doi:10.1001/jama.1937.02780280069054
25 Mennella JA, Beauchamp GK. Beer, breast feeding, and folklore. Dev Psychobiol 1993;26:459–66.8293892
26 Mennella JA. Infants' suckling responses to the flavor of alcohol in mothers' milk. Alcohol Clin Exp Res 1997;21:581–5.9194908
27 Mennella JA. Regulation of milk intake after exposure to alcohol in mothers' milk. Alcohol Clin Exp Res 2001;25:590–3.11329500
28 Mennella JA, García PL, Khan SH. Effects of exposure to alcohol and nicotine in mother's milk on infant sleep: A follow-up study. Alcohol Clin Exp Res 2000;24 (5 Suppl) :59A. doi:10.1111/j.1530-0277.2000.tb04682.x
29 Mennella JA, García-Gómez PL. Sleep disturbances after acute exposure to alcohol in mothers' milk. Alcohol 2001;25:153–8.11839458
30 Schuetze P, Das Eiden R, Chan AW. The effects of alcohol in breast milk on infant behavioral state and mother-infant feeding interactions. Infancy 2002;3:349–63.33451218
31 Little RE, Anderson KW, Ervin CH, et al. Maternal alcohol use during breast-feeding and infant mental and motor development at one year. N Engl J Med 1989;321:425–30.2761576
32 Little RE, Northstone K, Golding J, et al. Alcohol, breastfeeding, and development at 18 months. Pediatrics 2002;109:E72.11986478
33 Flores-Huerta S, Hernandez-Montes H, Argote RM, et al. Effects of ethanol consumption during pregnancy and lactation on the outcome and postnatal growth of the offspring. Ann Nutr Metab 1992;36:121–8.1530279
34 Backstrand JR, Goodman AH, Allen LH, et al. Pulque intake during pregnancy and lactation in rural Mexico: Alcohol and child growth from 1 to 57 months. Eur J Clin Nutr 2004;58:1626–34.15280906
35 Church MW, Subramanian MG, Wyllie-Fadell L, et al. Maternal alcohol use and breastfeeding: II. Infant outcome at one year of age. Alcohol Clin Exp Res 2002;26 (Suppl 5):117A. doi:10.1111/j.1530-0277.2002.tb05675.x
36 Magnus MC, Deroo LA, Haberg SE, et al. Prospective study of maternal alcohol intake during pregnancy or lactation and risk of childhood asthma: The Norwegian Mother and Child Cohort Study. Alcohol Clin Exp Res 2014;38:1002–11.24460824
37 May PA, Hasken JM, Blankenship J, et al. Breastfeeding and maternal alcohol use: Prevalence and effects on child outcomes and fetal alcohol spectrum disorders. Reprod Toxicol 2016;63:13–21.27174445
38 Hon KL, Leung AK, Cheung E, et al. An overview of exposure to ethanol-containing substances and ethanol intoxication in children based on three illustrated cases. Drugs Context 2018;7:212512.29344053
39 Hon KL, Wong YC, Chau IK, et al. Alcohol exposure in breastfed neonates associated with Chinese chicken wine. Indian J Pediatr 2016;83:1495–6.27349563
40 Wilson J, Tay RY, McCormack C, et al. Alcohol consumption by breastfeeding mothers: Frequency, correlates and infant outcomes. Drug Alcohol Rev 2017;36:667–76.28295774
41 Gibson L, Porter M. Drinking or smoking while breastfeeding and later cognition in children. Pediatrics 2018;142:e20174266.30061301
42 Gibson L, Porter M. Drinking or smoking while breastfeeding and later academic outcomes in children. Nutrients 2020;12:829.32244947
43 Gibson L, Porter M. Drinking or smoking while breastfeeding and later developmental health outcomes in children. BMC Res Notes 2020;13:232.32336274
44 Beauchamp GA, Hendrickson RG, Horowitz BZ, et al. Exposures through breast milk: An analysis of exposure and information calls to U.S. poison centers, 2001-2017. Breastfeed Med 2019;14:508–12.31211594
45 Gibson L, Porter M. Maternal drinking and smoking. Can it explain the exceptional academic performance of LBOTE children? A preliminary analysis. BMC Res Notes 2021;14:141.33863380
46 Edwards AC, Jacobson SW, Senekal M, et al. Fetal alcohol-related postnatal growth restriction is independent of infant feeding practices and postnatal alcohol exposure in a prospective South African birth cohort. Nutrients 2023;15:2018.37432143
47 López EX, Iturria GM, Castro K, et al. Alcohol consumption during breastfeeding: Prevalence and impact on infants under one year of age. An Fac Med Montev 2024https://revistas.udelar.edu.uy/OJS/index.php/anfamed/article/view/1744
48 Wei SY, Hu HY, Pan CH. Underage deaths associated with substance-related harm in Taiwan: A national 10-year study. Addiction 2026;121:1920–6.41755806
49 Cobo E, Quintero CA. Milk-ejecting and antidiuretic activities under neurohypophyseal inhibition with alcohol and water overload. Am J Obstet Gynecol 1969;105:877–87.5348764
50 Cobo E. Effect of different doses of ethanol on the milk-ejecting reflex in lactating women. Am J Obstet Gynecol 1973;115:817–21.4688584
51 Coiro V, Alboni A, Gramellini D, et al. Inhibition by ethanol on the oxytocin response to breast stimulation in normal women and the role of endogenous opioids. Acta Endocrinol (Copenh) 1992;126:213–6.1574949
52 Lex BW, Ellingboe JE, Teoh SK, et al. Prolactin and cortisol levels following acute alcohol challenges in women with and without a family history of alcoholism. Alcohol 1991;8:383–7.1797033
53 Sarkola T, Makisalo H, Fukunaga T, et al. Acute effect of alcohol on estradiol, estrone, progesterone, prolactin, cortisol, and luteinizing hormone in premenopausal women. Alcohol Clin Exp Res 1999;23:976–82.10397281
54 Soyka M, Gorig E, Naber D. Serum prolactin increase induced by ethanol--a dose-dependent effect not related to stress. Psychoneuroendocrinology 1991;16:441–6.1805295
55 Volpi R, Chiodera P, Gramellini D, et al. Endogenous opioid mediation of the inhibitory effect of ethanol on the prolactin response to breast stimulation in normal women. Life Sci 1994;54:739–44.8107524
56 Mennella JA, Pepino MY. Breastfeeding and prolactin levels in lactating women with a family history of alcoholism. Pediatrics 2010;125:e1162–70.20403941
57 Mennella JA. Short-term effects of maternal alcohol consumption on lactational performance. Alcohol Clin Exp Res 1998;22:1389–92.9802517
58 Giglia RC, Binns CW, Alfonso HS, et al. The effect of alcohol intake on breastfeeding duration in Australian women. Acta Paediatr 2008;97:624–9.18394108
59 De Rosa G, Corsello SM, Ruffilli MP, et al. Prolactin secretion after beer. Lancet 1981;2:934.6117712
60 Carlson HE, Wasser HL, Reidelberger RD. Beer-induced prolactin secretion: A clinical and laboratory study of the role of salsolinol. J Clin Endocrinol Metab 1985;60:673–7.3972968
61 Sawagado L, Houdebine LM. Identification of the lactogenic compound present in beer. Ann Biol Clin (Paris) 1988;46:129–34.3382062
62 Koletzko B, Lehner F. Beer and breastfeeding. Adv Exp Med Biol 2000;478:23–8.11065057
63 Mennella JA, Pepino MY. Biphasic effects of moderate drinking on prolactin during lactation. Alcohol Clin Exp Res 2008;32:1899–908.18715274
64 Codoñer-Franch P, Hernández-Aguilar MT, Navarro-Ruíz A, et al. Diet supplementation during early lactation with non-alcoholic beer increases the antioxidant properties of breastmilk and decreases the oxidative damage in breastfeeding mothers. Breastfeed Med 2013;8:164–9.23186386
65 Rocha BO, Machado MP, Bastos LL, et al. Risk factors for delayed onset of lactogenesis II among primiparous mothers from a Brazilian Baby-Friendly hospital. J Hum Lact 2020;36:146–56.30901295

## Substance Identification

### Substance Name

Alcohol

### CAS Registry Number

64-17-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Central Nervous System Depressants